# Inclisiran

CASRN: 1639324-58-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of inclisiran during breastfeeding. Because inclisiran is a large oligonucleotide, the amount in milk is likely to be very low and absorption by the infant is probably minimal. If inclisiran is required by the mother, it is not a reason to discontinue breastfeeding. Until more data become available, inclisiran should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cholestyramine (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM515/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Colestipol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM514/)

## Substance Identification

### Substance Name

Inclisiran

### CAS Registry Number

1639324-58-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticholesteremic Agents

Hypolipidemic Agents

RNA, Small Interfering